# Metyrapone

CASRN: 54-36-4

## Drug Levels and Effects

### Summary of Use during Lactation

Evidence from two patients indicate that amounts of metyrapone and its active metabolite in breastmilk are very small and unlikely to adversely affect a breastfed infant. Exposure of the infant can be markedly decreased by avoiding nursing for 2 to 2.5 hours after each dose.

### Drug Levels

Metyrapone is metabolized to the active metabolite, metyrapol, which has a longer half-life than metyrapone.

Maternal Levels. A woman was taking metyrapone 250 mg orally 4 times daily by mouth during pregnancy and postpartum for Cushing's disease. At 1 week postpartum, milk samples were obtained before the midday dose and at 1.25, 2.25, 3.25, 4.24 and 5.25 hours after the dose. Samples were analyzed for metyrapone and metyrapol. Peak milk concentrations of the drug and metabolite occurred at 1.25 hours after the dose; by 2.25 hours after the dose, milk levels had dropped by about 75%. Half-lives in milk were 3.63 hours for metyrapone and 34 hours for metyrapol. The authors calculated that the combined dosage a fully breastfed infant would receive is 9 mcg/kg daily or 0.1% of the weight-adjusted maternal dosage.[1]

A woman was diagnosed with Cushing's disease during pregnancy and managed with an average oral dose of 750 mg daily. Postpartum, she took metyrapone 250 mg 3 times daily, as well as bisoprolol 10 mg and captopril 12.5 mg twice a day. Starting at 5 weeks postpartum she collected serial breastmilk samples over 6 hours on 3 separate occasions and over 24 hours at another time. Peak milk levels of the drug and metabolite occurred at about 30 minutes after a dose. The milk values for metyrapone and metyrapol differed with the sampling scheme, with higher average amounts when milk as sampled every 30 minutes rather than every hour. Average milk metyrapone concentrations were 176 and 10 mcg/L with the 30-minute and 60-minute collection methods, respectively. Average milk metyrapol concentrations were 310 and 19 mcg/L with the 30-minute and 60-minute collection methods, respectively. Foremilk and hindmilk concentrations were similar. The apparent half-lives were 33 minutes for metyrapone and 67 minutes for metyrapol. The infant dosage of the combined drugs was 73 mcg/kg daily, which is 820 times lower than the lowest recommend dose used in pediatric diagnostic testing. Average total weight adjusted dosages of metyrapone plus metyrapol were calculated to be 1.9% with 30-minute sampling and 0.1% with 60-minute sampling.[2] These results indicate that avoiding breastfeeding for at least an hour after a dose will markedly decrease infant exposure.

Infant Levels. A woman was taking metyrapone 250 mg 3 times daily. She breastfed her preterm infant about 50% milk and 50% formula. At 5 weeks postpartum, infant blood was collected 1 hour after receiving 40 mL of expressed breastmilk that had been collected 3 hours after a 250 mg maternal dose of metyrapone. The infant plasma concentrations of metyrapone and metyrapol were 0.05 mcg/L and 4 mcg/L, respectively. Comparable maternal serum values were 41.5 mcg/L and 338 mcg/L, respectively.[2]

### Effects in Breastfed Infants

A woman was taking metyrapone 250 mg 3 times daily, as well as bisoprolol 10 mg and captopril 12.5 mg twice a day postpartum. She breastfed her preterm infant about 50% milk and 50% formula. At 5 weeks postpartum, infant blood was collected. ACTH was 160 ng/L, cortisol was 98 nmol/L, 11-deoxycortisol was 2 nmol/L, sodium was 133 mmol/L, and potassium was 4.8 mmol/L. All values were within normal limits and his pediatric team found his growth and development to be appropriate.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. Women taking metyrapone chronically for suppression of hypercorticism associated with Cushing's syndrome may have other hormonal abnormalities that might interfere with lactation.

### References

1 Hotham NJ, Ilett KF, Hackett LP, et al. (2009). Transfer of metyrapone and its metabolite, rac-metyrapol, into breast milk. J Hum Lact.
2 Duke ME, Britten FL, Pretorius CJ, et al. (2019). Maternal metyrapone use during breastfeeding: Safe for the breastfed infant. J Endocr Soc.

## Substance Identification

### Substance Name

Metyrapone

### CAS Registry Number

54-36-4

### Drug Class

Breast Feeding

Lactation

Antimetabolites

Enzyme Inhibitors